# Orforglipron

CASRN: 2212020-52-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of orforglipron during breastfeeding. Until more information is available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Semaglutide, Tirzepatide

## Substance Identification

### Substance Name

Orforglipron

### CAS Registry Number

2212020-52-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Glucagon-Like Peptide-1 Agonists

GLP-1 Agonists

Hypoglycemic Agents